# Etoricoxib

CASRN: 202409-33-4

## Drug Levels and Effects

### Summary of Use during Lactation

Etoricoxib is not approved for marketing in the United States by the U.S. Food and Drug Administration but is available in other countries. No information is available on the use of etoricoxib during breastfeeding. Because it is 92% protein bound, the amounts in milk are likely to be very low. Some guidelines recommend avoiding etoricoxib because of a lack of data during breastfeeding.[1] An alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acetaminophen, Flurbiprofen, Ibuprofen, Indomethacin, Naproxen, Piroxicam

### References

1 Rüegg L, Pluma A, Hamroun S, et al. EULAR recommendations for use of antirheumatic drugs in reproduction, pregnancy, and lactation: 2024 update. Ann Rheum Dis 2025.40287311

## Substance Identification

### Substance Name

Etoricoxib

### CAS Registry Number

202409-33-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Inflammatory Agents, Non-Steroidal